# Olezarsen

CASRN: 2097587-83-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of olezarsen during breastfeeding. Because olezarsen is more than 99% bound to plasma proteins, the amount in milk is likely to be low. The oral bioavailability is also low, so systemic exposure in the infant should be very low. If a mother requires olezarsen, it is not a reason to discontinue breastfeeding. Although unlikely, observe infants for hypersensitivity reactions (including symptoms of bronchospasm, diffuse erythema, facial swelling, urticaria, chills, and myalgias).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Olezarsen

### CAS Registry Number

2097587-83-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypolipidemic Agents

Lipid Regulating Agents

Oligonucleotides